# Marshmallow

CASRN: 73049-65-7

## Drug Levels and Effects

### Summary of Use during Lactation

Marshmallow (Althaea officinalis) root contains polysaccharide mucilage composed L-rhamnose, D-galactose, D-galacturonic acid, and D-glucuronic acid. Topical marshmallow preparations have been advocated for treating sore, cracked nipples[1] and breast pain.[2] Orally, marshmallow is a purported galactogogue,[3,4] and is included in some proprietary mixtures promoted to increase milk supply; however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[5,6] No data exist on the excretion of any components of marshmallow into breastmilk or on the safety and efficacy of marshmallow in nursing mothers or infants. Marshmallow is generally well tolerated in adults, with allergic reactions reported rarely. Marshmallow is "generally recognized as safe" (GRAS) in amounts found in foods by the U.S. Food and Drug Administration. Although no data exist on the safety of marshmallow root during breastfeeding, it is unlikely to be harmful to the breastfed infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A small manufacturer-sponsored, double-blind, randomized study compared Mother's Milk tea (Traditional Medicinals, Sebastopol, CA) to lemon verbena tea in exclusively breastfeeding mothers with milk insufficiency. Each Mother's Milk tea bag contained an unspecified amount of marshmallow root as well as several other herbs. Mothers were instructed to drink 3 to 5 cups of tea daily. No differences were seen between groups in infant digestive, respiratory, dermatological, and other maternal-reported adverse events. No differences were seen in the growth parameters of the breastfed infants between the two groups.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stapleton H. The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery 1995;1:165-7.9456733
2 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93-100. doi:10.1089/act.1997.3.93
3 Scott CR, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38-9.16320878
4 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
5 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
6 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
7 Wagner CL, Boan AD, Marzolf A, et al. The safety of Mother's Milk(R) Tea: Results of a randomized double-blind, controlled study in fully breastfeeding mothers and their infants. J Hum Lact 2019;35:248–60.30005170

## Substance Identification

### Substance Name

Marshmallow

### Scientific Name

Althaea officinalis

### CAS Registry Number

73049-65-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal